# Amiloride

CASRN: 2609-46-3

## Drug Levels and Effects

### Summary of Use during Lactation

Minimal information on the use of amiloride during breastfeeding found a slightly elevated serum potassium and low serum and urinary magnesium levels in one breastfed infant, suggested a systemic effect. An alternate drug may be preferred.

### Drug Levels

Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Intense diuresis can suppress lactation;[1,2] however, it is unlikely that amiloride alone is sufficiently potent to cause this effect.

A woman with Gitelman syndrome was prescribed amiloride 5 mg daily. She became pregnant and delivered a healthy infant. Amiloride was initially discontinued during breastfeeding, but restarted at 6 weeks postpartum. While on amiloride, the baby’s laboratory values showed a serum potassium of 5.8 mmol/L and a serum magnesium of 2.3 mg/dL. Spot urine concentrations of magnesium were < 1.4 mg/dL, urine creatinine was 5 mg/dL, and urine potassium was 5 mmol/L. Amiloride was stopped for one week and laboratory tests were repeated. Serum potassium was 4.8 mmol/L, magnesium was 2.2 mg/dL and a urine magnesium concentration was 1.7 mg/dL. Urine creatinine was 8 mg/dL, and urine potassium was 6 mmol/L.[3]

### Alternate Drugs to Consider

Spironolactone

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277:1353-4. doi:10.1016/S0140-6736(61)90289-6
2 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858
3 Ibrahim A, Rodan AR, Westenfelder C, et al. Gitelman syndrome patient managed with amiloride during pregnancy and lactation. BMC Nephrol 2024;25:403.39521975

## Substance Identification

### Substance Name

Amiloride

### CAS Registry Number

2609-46-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diuretics